# Dextromethorphan

CASRN: 125-71-3

## Drug Levels and Effects

### Summary of Use during Lactation

When used as a cough syrup, amounts of dextromethorphan and its active metabolite in breastmilk are very low and are not expected to affect the nursing infant. It is best to avoid the use of products with a high alcohol content while nursing. The manufacturer of the combination of dextromethorphan and bupropion (Auvelity) recommends avoiding breastfeeding during treatment, and for 5 days after the last dose.

### Drug Levels

Dextromethorphan is metabolized to its active metabolite of dextrorphan by CYP2D6. Dextrorphan is further metabolized to dextrorphan glucuronide by UGT2B.

Maternal Levels. Twenty nursing mothers who were extensive metabolizers of CYP2D6 donated a blood sample and completely emptied one breast 2 hours after a single oral dose of dextromethorphan 30 mg. All mothers were at least 3 months postpartum and subjects who were poor, intermediate, or ultra-rapid metabolizers were excluded from the study. The average milk concentration of dextromethorphan at the presumed peak of 2 hours after the dose was 2.5 mcg/L (95% CI 1.5 to 3.9 mcg/L). The average milk concentration of the active metabolite dextrorphan at that time was 14 mcg/L (95% CI 10.7 to 17.9 mcg/L). These values translated to average “worst-case” daily infant dosages of 0.33 mcg/kg and 1.8 mcg/kg, and relative infant dosages of 0.07% and 0.41% for dextromethorphan and dextrorphan, respectively. The authors used published values of serum concentrations after a typical 60 mg twice daily dosage regimen to estimate average steady-state relative infant dosages of 0.04% and 0.07% for dextromethorphan and dextrorphan, respectively.[1] The potential contribution of dextrorphan glucuronide to infant dosage in neonates, who can deconjugate glucuronides some compounds, was not estimated.

Eight women who were given dextromethorphan (dose not specified) following a full-term cesarean section delivery provided milk samples at 4 to 6 hours after their third dose. The authors calculated median estimated relative infant doses to be 0.239% for dextromethorphan and 0.288% for its major active metabolite, dextrorphan.[2]

Infant Levels. Blood samples were obtained at an unspecified time from 8 breastfed infants whose mothers were given dextromethorphan (dose not specified) following a full-term cesarean section delivery. Only one of the 8 infants had a detectable plasma concentration of dextromethorphan. This infant’s mother had a much higher milk level of dextromethorphan than the other 7 women.[2]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Shum S, Yadav A, Fay E, et al. Infant dextromethorphan and dextrorphan exposure via breast milk from mothers who are CYP2D6 extensive metabolizers. J Clin Pharmacol 2022;62:747-55.34889461
2 Lieberman D, O'Brien D, Meyers R, et al. Assessment of dextromethorphan concentration in human breast milk. Am J Obstet Gynecol 2023;228:S119. doi:10.1016/j.ajog.2022.11.242

## Substance Identification

### Substance Name

Dextromethorphan

### CAS Registry Number

125-71-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antitussive Agents